# Lenalidomide

CASRN: 191732-72-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of lenalidomide during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during lenalidomide therapy.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lenalidomide

### CAS Registry Number

191732-72-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents

Angiogenesis Inhibitors